# Palivizumab

CASRN: 188039-54-5

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of palivizumab during breastfeeding. Because palivizumab is a large protein molecule with a molecular weight of about 148,000 Da, the amount in milk is likely to be very low.[1] Palivizumab appears to be degraded in the infant’s gastrointestinal tract by about 20% after 1 hour and up to 36% at 2 hours in one study and 50 to 62% in others.[2-5] Normal maternal milk antibodies against respiratory syncytial virus are not degraded under the same conditions.[2] Absorption of the undigested antibodies by the infant is probably minimal.[6]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Stratigakis A, Paty D, Zou P, et al. A regression approach for assessing large molecular drug concentration in breast milk. Reprod Breed 2023;3:199-207. doi:10.1016/j.repbre.2023.10.003
2 Lueangsakulthai J, Sah BNP, Scottoline BP, Dallas DC. Survival of recombinant monoclonal antibodies (IgG, IgA and sIgA) versus naturally-occurring antibodies (IgG and sIgA/IgA) in an ex vivo infant digestion model. Nutrients 2020;12:621.32120792
3 Demers-Mathieu V, Lueangsakulthai J, Qu Y, et al. Binding and neutralizing capacity of respiratory syncytial virus (RSV)-specific recombinant IgG against RSV in human milk, gastric and intestinal fluids from infants. Nutrients 2020;12:1904.32605037
4 Sah BNP, Lueangsakulthai J, Kim BJ, et al. Partial degradation of recombinant antibody functional activity during infant gastrointestinal digestion: Implications for oral antibody supplementation. Front Nutr 2020;7:130.32923453
5 Lueangsakulthai J, Sah BNP, Scottoline BP, Dallas DC. Survival of recombinant monoclonal and naturally-occurring human milk immunoglobulins A and G specific to respiratory syncytial virus F protein across simulated human infant gastrointestinal digestion. J Funct Foods 2020;73:104115.33101461
6 Anderson PO. Monoclonal antibodies during breastfeeding. Breastfeed Med 2021;16:591-3.33956488

## Substance Identification

### Substance Name

Palivizumab

### CAS Registry Number

188039-54-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal

Antibodies, Viral

Antiviral Agents